# Irbesartan

CASRN: 138402-11-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of irbesartan during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Irbesartan

### CAS Registry Number

138402-11-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers

Angiotensin Receptor Blockers